# Belimumab

CASRN: 356547-88-1

## Drug Levels and Effects

### Summary of Use during Lactation

Preliminary information and a predictive model indicate that belimumab levels in milk are very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2,3] If belimumab is required by the mother, it is not a reason to discontinue breastfeeding. Some international guidelines consider belimumab to be acceptable during breastfeeding.[4,5] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[6]

### Drug Levels

Maternal Levels. A postpartum woman with mixed connective tissue disease was started on intravenous belimumab 520 mg (10 mg/kg) every 2 weeks for 2 doses, then 520 mg monthly as well as hydroxychloroquine 200 to 400 mg daily. Belimumab milk concentrations were 0.12 mg/L at 2 weeks after the first dose and prior to the second dose, 0.17 mg/L on the following day, and 0.12 mg/L at 7 weeks after the second dose.[7]

Two lactating women with systemic lupus erythematosus who were receiving belimumab 200 mg subcutaneously every 2 weeks donated milk samples postpartum at starting at 3 to 4 days postpartum. Milk concentrations were highest at about 3 days after the dose at about 75 mcg/L in one woman and about 125 mcg/L in the other. At 7 days after the dose, milk levels remained relatively constant in the first woman and decreased to about 90 mcg/L in the second.[8]

A woman with systemic lupus erythematosus was started on belimumab 200 mg subcutaneously every two weeks and discontinued breastfeeding at 3 months postpartum. She continued to pump milk to avoid engorgement. Two milk samples were analyzed for belimumab. On day 14 after 2 doses of the drug, an evening milk sample contained 0.264 mg/L of belimumab and a second sample taken on day 28 before the fifth dose contained 0.885 mg/L.[9]

A woman with relapsing-remitting small-fiber neuropathy had a remission at two months postpartum. She resumed weekly subcutaneous belimumab injections of 1800 mg. Breastfeeding and normal infant development continued through 19 months postpartum at the time of the report.[10]

Three women were receiving belimumab for systemic lupus erythematosus. Two were receiving a dose of 200 mg subcutaneously every 2 weeks, with the previous dose 1 day prior to delivery. In one woman, breastmilk samples were collected at five different time points from 2 to 5 days postpartum and the concentrations ranged from 0.2 to 0.6 mg/L. In the second woman, breast milk samples were collected at six different time points from 1 to 30 days postpartum with concentrations ranging from 0.12 to 0.17 mg/L. A third woman was receiving a dose of 400 mg intravenously once a month, with doses 3 weeks prior to delivery and 5 days postpartum. Milk levels ranged from 0.49 to 1.14 mg/L at seven time points from 4 to 27 days postpartum.[11]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with systemic lupus erythematosus was taking belimumab (dose not stated) for 1 year when she became pregnant. She received monthly belimumab infusions during pregnancy and continued postpartum, starting at 2 weeks postpartum. She breastfed her infant (extent not stated). No infant effects were mentioned.[12]

Three women with systemic lupus erythematosus were taking belimumab, in doses of 200 mg subcutaneously every 2 weeks in two women and 400 mg intravenously once a month in the other. One infant was hospitalized for surgical treatment of left vesicoureteral reflux, but peripheral T and B lymphocyte counts, and gamma globulin were normal at 20 months of age. The infant received all required vaccinations, both live and inactivated, with no adverse reactions, and adequate antibody levels against hepatitis B, measles, and rubella at 18 months of age. The second infant had low peripheral B and transitional B cell counts at birth, but the infants’ T cell counts, and serum IgG levels were within normal range. The infant received all the required live and inactivated vaccines with no adverse events following vaccination. Follow-up of these infants at 2 years revealed no adverse developmental outcomes. The infant of the mother receiving 400 mg monthly had decreased peripheral B, transitional B, and NK cell counts at birth, but a normal T cell count and serum IgG level. The infant was monitored for 6 months, with no adverse developmental outcomes.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
4 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
5 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
6 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
7 Saito J, Yakuwa N, Ishizuka T, et al. Belimumab concentrations in maternal serum and breast milk during breastfeeding and the safety assessment of the infant: A case study. Breastfeed Med 2020;15:475–7.32326740
8 Saito J, Yakuwa N, Hosokawa Y, et al. Establishment of a measurement system to evaluate breast milk transfer of biological agents using dry filter paper: A multi-institutional study. Br J Clin Pharmacol 2024;90:146–57.37548054
9 Blomjous BS, de Boer MA, van Weissenbruch MM, et al. Concentrations of subcutaneously administered belimumab in human breast milk of a woman with systemic lupus erythematosus: A case report. Lupus Sci Med 2024;11:e001167.38499356
10 Oaklander AL, Allen J, Dietliker N, et al. Relapsing-remitting immunotherapy responsive small-fiber neuropathy: longitudinal tracking through 10 years including pregnancies. Neurol Neuroimmunol Neuroinflamm 2024;11:e200286.39047208
11 Higuchi A, Saito J, Fujimori K, et al. Placental and breast milk transfer of belimumab in three patients with systemic lupus erythematosus treated through pregnancy. Mod Rheumatol Case Rep 2025;9:rxaf038.40621948
12 Danve A, Perry L, Deodhar A. Use of belimumab throughout pregnancy to treat active systemic lupus erythematosus: A case report. Semin Arthritis Rheum 2014;44:195–7.25005336

## Substance Identification

### Substance Name

Belimumab

### CAS Registry Number

356547-88-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal